# Caplacizumab

CASRN: 915810-67-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of caplacizumab during breastfeeding. Because caplacizumab is a large protein molecule with a molecular weight of about 28,000 Da, the amount in milk is likely to be extremely low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Use of the drug after 2 weeks postpartum may minimize transfer to the infant.[1] Until more data become available, caplacizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Some opinion recommends that patients with acquired thrombotic thrombocytopenic purpura not breastfeed because anti-platelet sIgA might be present in milk and may adversely affect the infant.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
2 Alijotas-Reig J. Acquired thrombotic thrombocytopenic purpura and pregnancy: More light than shade but controversies remain. Thromb Res 2017;156:195-7.28697902

## Substance Identification

### Substance Name

Caplacizumab

### CAS Registry Number

915810-67-2

### Drug Class

Breast feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Single-Domain Antibodies